# Tixagevimab and Cilgavimab

CASRN: 2420564-02-7; 2420563-99-9

## Drug Levels and Effects

### Summary of Use during Lactation

The US FDA has withdrawn emergency-use authorization for tixagevimab and cilgavimab because of a lack of efficacy against some strains of SARS-CoV-2. These drugs are monoclonal antibodies directed against the SARS-CoV-2 virus that causes COVID-19 and used for prophylaxis in immune-compromised individuals. No information is available on their clinical use during breastfeeding. Because tixagevimab and cilgavimab are large protein molecules, the amount in milk is likely to be very low.[1] They are also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2] Until more data become available, tixagevimab and cilgavimab should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Nirmatrelvir, Remdesevir

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488

## Substance Identification

### Substance Name

Tixagevimab and Cilgavimab

### CAS Registry Number

2420564-02-7; 2420563-99-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal

Antibodies, Viral

Antiviral Agents